# Danazol

CASRN: 17230-88-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of danazol during breastfeeding, and it is considered to be contraindicated during breastfeeding.[1-4] An alternate drug is preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hereditary Angioedema) C1-esterase inhibitor

### References

1 Busse PJ, Christiansen SC, Riedl MA, et al. US HAEA Medical Advisory Board 2020 guidelines for the management of hereditary angioedema. J Allergy Clin Immunol Pract 2021;9:132-50.e3 32898710
2 Maurer M, Magerl M, Betschel S, et al. The international WAO/EAACI guideline for the management of hereditary angioedema-The 2021 revision and update. Allergy 2022;77:1961-90 35006617
3 Grumach AS, Gadir N, Kessel A, et al. Current challenges and future opportunities in patient-focused management of hereditary angioedema: A narrative review. Clin Transl Allergy 2023;13:e12243 37227422
4 Betschel S, Binkley K, Borici-Mazi R, et al. The International/Canadian hereditary angioedema guideline. Allergy Asthma Clin Immunol 2026 41606636

## Substance Identification

### Substance Name

Danazol

### CAS Registry Number

17230-88-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Estrogen Antagonists